# Capreomycin

CASRN: 11003-38-6

## Drug Levels and Effects

### Summary of Use during Lactation

Developmental problems have been reported in two infants exposed to capreomycin in breastmilk; however, their mothers were also exposed to several drugs during pregnancy and during breastfeeding, so the problems cannot necessarily be attributed to capreomycin. Because capreomycin is not orally absorbed it is unlikely to adversely affect the breastfed infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Capreomycin was used as part of multidrug regimens to treat two pregnant women with multidrug-resistant tuberculosis, one throughout pregnancy and postpartum and the other postpartum only. The infants were breastfed (extent and duration not stated). At age 4.6 and 5.1 years, the children were developing normally except for a mild speech delay in one and hyperactivity in the other.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Drobac PC, del Castillo H, Sweetland A, et al. (2005). Treatment of multidrug-resistant tuberculosis during pregnancy: long-term follow-up of 6 children with intrauterine exposure to second-line agents. Clin Infect Dis.

## Substance Identification

### Substance Name

Capreomycin

### CAS Registry Number

11003-38-6

### Drug Class

Breast Feeding

Lactation

Anti-Infective Agents

Antibacterial Agents

Antitubercular Agents